# Porfimer

CASRN: 87806-31-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of porfimer during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during porfimer therapy and for 5 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Porfimer

### CAS Registry Number

87806-31-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Dermatologic Agents

Photosensitizing Agents